# Atovaquone

CASRN: 95233-18-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of atovaquone during breastfeeding. However, the quantity of drug in breast milk is assumed too low to provide adequate protection against malaria for the breastfed infant.[1] A dosage has been established for infants weighing as little as 5 kg, so it is unlikely to adversely affect breastfed infants weighing 5 kg or more.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Chloroquine, Mefloquine

### References

1 Malaria. In: Centers for Disease Control and Prevention. CDC Yellow Book 2026: Health Information for International Travel. 2026. https://www.cdc.gov/yellow-book/hcp/travel-associated-infections-diseases/malaria.html#treatment

## Substance Identification

### Substance Name

Atovaquone

### CAS Registry Number

95233-18-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-infective Agents

Antiparasitic Agents

Antimalarials

Antiprotozoal Agents